# Viloxazine

CASRN: 46817-91-8

## Drug Levels and Effects

### Summary of Use during Lactation

The amounts of viloxazine and its active metabolite in milk appear to be low. If viloxazine is required by the mother of an older infant, it is not a reason to discontinue breastfeeding, but until more infant outcome data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. The manufacturer reports a study in 15 lactating women took viloxazine 600 mg daily for 3 days. The mean total amounts of viloxazine and its metabolite, 5-HVLX-gluc excreted in 24 hours at steady-state were 0.511 mg and 0.0357 mg, or 0.085 mg/kg and 0.00595 mg/kg, respectively in a 6 kg infant. These amounts were estimated to result in a relative infant dose of 1% and 0.07%, respectively.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(ADHD) Amphetamine, Dextroamphetamine, Lisdexamfetamine, Methylphenidate

## Substance Identification

### Substance Name

Viloxazine

### CAS Registry Number

46817-91-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic Uptake Inhibitors